# Antacids

## Drug Levels and Effects

### Summary of Use during Lactation

Although no published information on the aluminum, calcium or magnesium content of milk during maternal antacid therapy could be found, additional intake of these minerals by a nursing mother is unlikely to surpass that found in other infant foods. In addition, oral absorption of aluminum and magnesium is poor. Because of these factors, reviewers generally consider antacid use during breastfeeding to be acceptable.[1-3] No special precautions are required.

### Drug Levels

Maternal Levels. The aluminum content of human milk is normally lower than cow's milk and much lower than infant formula.[4,5] Magnesium is a normal component of human milk.[6] When magnesium is administered intravenously in large doses, milk magnesium levels are increased only slightly.[7] Calcium is a normal component of human milk.[6] Alginic acid and simethicone, which are components of some antacids are not absorbed orally.[1,8]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Cimetidine, Famotidine, Nizatidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Lewis JH, Weingold AB, Committee of FDA-Related Matters American College of Gastroenterology. (1985). The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol.
2 Broussard CN, Richter JE. (1998). Treating gastro-oesophageal reflux disease during pregnancy and lactation: What are the safest therapy options?. Drug Saf.
3 Richter JE. (2005). Review article: The management of heartburn in pregnancy. Aliment Pharmacol Ther.
4 Fernández-Lorenzo JR, Cocho JA, Rey-Goldar ML, et al. (1999). Aluminum contents of human milk, cow's milk, and infant formulas. J Pediatr Gastroenterol Nutr.
5 Mandić ML, Grgić J, Grgić Z, et al. (1995). Aluminum levels in human milk. Sci Total Environ.
6 Neville MC. (2005). Calcium secretion into milk. J Mammary Gland Biol Neoplasia.
7 Cruikshank DP, Varner MW, Pitkin RM. (1982). Breast milk magnesium and calcium concentrations following magnesium sulfate treatment. Am J Obstet Gynecol.
8 Hagemann TM. (1998). Gastrointestinal medications and breastfeeding. J Hum Lact.

## Substance Identification

### Substance Name

Antacids

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antacids, Oral

Anti-Ulcer Agents

Gastrointestinal Agents